# Granisetron

CASRN: 109889-09-0

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of granisetron during breastfeeding. Until more data become available, granisetron should be used with caution during breastfeeding. An alternate drug may be preferred.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A woman nursing an 8-month-old infant 6 to 8 times daily was admitted to the hospital for an appendectomy. During the procedure she received granisetron, cefazolin, ketorolac, rocuronium, succinylcholine, and sufentanil. The patient also received 2 boluses of intravenous propofol of 150 mg followed shortly thereafter by a 50 mg dose. Postoperatively, she was receiving acetaminophen, cefazolin, ibuprofen, and pantoprazole, as well as oxycodone and dimenhydrinate as needed. Twenty-two hours after the procedure, the mother extracted milk for the first time and noted it to be light green in color. Analysis of the green milk using a nonvalidated assay detected no propofol. The green color faded and was absent by postoperative day 4 when she resumed breastfeeding. The authors judged that the green color was possibly caused by propofol or one of its metabolites.[1]

### Alternate Drugs to Consider

Ondansetron

### References

1 Rainone A, Delucilla L, Elofer S, et al. (2018). Propofol-induced green breast milk: A case report. Can J Hosp Pharm.

## Substance Identification

### Substance Name

Granisetron

### CAS Registry Number

109889-09-0

### Drug Class

Breast Feeding

Lactation

Antiemetics

Gastrointestinal Agents

Serotonin Antagonists

Serotonin 5-HT3 Receptor Antagonists